# Favipiravir

CASRN: 259793-96-9

## Drug Levels and Effects

### Summary of Use during Lactation

Favipiravir is an antiviral drug that is not approved in the United States by the US Food and Drug Administration. Information from one patient indicates that milk levels are low with a peak level at about 1.5 to 2 hours. Avoiding nursing around the peak time could markedly reduce the infant’s dose. One infant has reportedly been breastfed by a mother receiving favipiravir and pumping her breasts after doses with no adverse effects reported in the infant. Favipiravir has caused liver enzyme abnormalities, gastrointestinal symptoms, and serum uric acid elevations.[1,2] If favipiravir is used in a nursing mother, these parameters should be monitored in the breastfed infant.

### Drug Levels

Maternal Levels. A lactating woman took a single 200 mg dose of favipiravir (Favimol, Neutec Pharmaceutical Company) and provided milk samples at 0.5, 2 and 4 hours after the dose. Milk concentrations were 0.3, 5.5 and 2.7 mg/L, respectively.[3]

A woman took favipiravir 1,800 mg twice daily on day 1 and 800 mg twice daily on days 2 to 11 of therapy. She was not nursing her infant, but donated milk samples at about 13.5 hours after the previous dose and about 1.5 hours after the morning oral dose on day 9 of therapy. On day 10 of therapy, another milk sample was collected before the morning dose and a final sample was collected on day 11 of therapy 22 hours after the mother’s last dose. The highest favipiravir concentration of 80.9 mg/L was in the sample collected at 1.5 hours after the dose. The favipiravir concentrations in all other samples ranged from 3 to 9.7 mg/L.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A nursing mother with a positive PCR for COVID-19 was prescribed favipiravir with a loading dose of 1600 mg twice on the first day, then 600 mg every 12 hours from day 2 to day 5. She breastfed her 15-month-old COVID-19-negative infant just before each dose of the drug. She pumped and discarded her milk between doses. No symptoms were observed in the baby during drug use and no abnormalities were detected in the baby’s hematological and biochemistry tests. The infant was followed for 6 months and was fed breastmilk and complementary feeding, did not develop any symptoms.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Nirmatrelvir, Remdesevir

### References

1 Sissoko D, Laouenan C, Folkesson E, et al. Experimental treatment with favipiravir for Ebola virus disease (the JIKI Trial): A historically controlled, single-arm proof-of-concept trial in Guinea. PLoS Med 2016;13:e1001967.26930627
2 Scavone C, Brusco S, Bertini M, et al. Current pharmacological treatments for COVID-19: What's next? Br J Pharmacol 2020;177:4813-24.32329520
3 Tiris G, Gazioglu I, Furton KG, et al. Fabric phase sorptive extraction combined with high performance liquid chromatography for the determination of favipiravir in human plasma and breast milk. J Pharm Biomed Anal 2022;223:115131.36395627
4 Wada YS, Saito J, Yamamoto W, et al. Safety of breastfeeding during favipiravir therapy: A case study. J Hum Lact 2024;41:65-9.39588699
5 Karabayır N, Doğan Öçal O, Canbeyli G. Use of favipiravir in lactating mother with COVID-19. Turk Arch Pediatr 2021;56:533-4.35110126

## Substance Identification

### Substance Name

Favipiravir

### CAS Registry Number

259793-96-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiviral Agents